# Estazolam

CASRN: 29975-16-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of estazolam during breastfeeding. Because of the long duration of action of estazolam, an alternate hypnotic is preferred, especially while nursing a newborn or preterm infant. If estazolam is used, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zaleplon, Zolpidem

## Substance Identification

### Substance Name

Estazolam

### CAS Registry Number

29975-16-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Benzodiazepines

Hypnotics and Sedatives